# Pibrentasvir

CASRN: 1353900-92-1

## Drug Levels and Effects

### Summary of Use during Lactation

Pibrentasvir has not been studied in nursing mothers being treated for hepatitis C infection. Because it is >99.9% bound to maternal plasma proteins, amounts in breastmilk are likely to be very low.

Hepatitis C is not transmitted through breastmilk and breastmilk has been shown to inactivate hepatitis C virus (HCV).[1–4] However, the Centers for Disease Control recommends that mothers with HCV infection should consider abstaining from breastfeeding if their nipples are cracked or bleeding. It is not clear if this warning would apply to mothers who are being treated for hepatitis C.

Infants born to mothers with HCV infection should be tested for HCV infection; because maternal antibody is present for the first 18 months of life and before the infant mounts an immunologic response, nucleic acid testing is recommended.[1,4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Peginterferon Alfa, Sofosbuvir

### References

1 Cottrell EB, Chou R, Wasson N, . Reducing risk for mother-to-infant transmission of hepatitis C virus: A systematic review for the U.S. Preventive Services Task Force. Ann Intern Med 2013;158:109–13.23437438
2 Pfaender S, Heyden J, Friesland M, . Inactivation of hepatitis C virus infectivity by human breast milk. J Infect Dis 2013;208:1943–52.24068703
3 Tovo PA, Calitri C, Scolfaro C, . Vertically acquired hepatitis C virus infection: Correlates of transmission and disease progression. World J Gastroenterol 2016;22:1382–92.26819507
4 Workowski KA, Bachmann LH, Chan PA, . Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.

## Substance Identification

### Substance Name

Pibrentasvir

### CAS Registry Number

1353900-92-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

NS5A Inhibitors